# Birch Triterpenes

CASRN: 545-48-2; 473-98-3; 472-15-1; 545-47-1; 508-02-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of birch triterpenes during breastfeeding. Birch triterpenes appear to be poorly absorbed after topical application, so it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Birch Triterpenes

### CAS Registry Number

545-48-2; 473-98-3; 472-15-1; 545-47-1; 508-02-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents